# COVID-19 Vaccines

## Drug Levels and Effects

### Summary of Use during Lactation

Many studies involving thousands of women who received a SARS-CoV-2 (COVID-19) vaccine and their infants have been reported in the literature. No evidence suggests that receiving a vaccine against SARS-CoV-2 is harmful to either the nursing mother or the breastfed infant.[1] Antibodies and T-cells that neutralize the SARS-CoV-2 virus appear in the milk after maternal vaccination.[2-6] Neutralizing capacity may increase even while antibody levels drop.[7] Nursing mothers experience minimal disruption of breastfeeding after vaccination, which may be related to having systemic symptoms.[8] A few mothers have reported to blue or blue-green discoloration of their milk.[9-14] A small percentage of breastfed infants may experience sleepiness, increased fussiness, fever, rash or self-limiting diarrhea, but no serious adverse effects have been reported. Numerous professional organizations and governmental health authorities recommend that COVID-19 vaccines be offered to those who are breastfeeding because the potential benefits of maternal vaccination during lactation outweigh any theoretical risks.[15-25]

Only a small percentage of milk samples from women who received an mRNA vaccine (Comrinaty, Pfizer-BioNTech; Spikevax, Moderna) contain trace amounts of mRNA in some, but not all studies. mRNA has not been detected in the serum of any breastfed infants.[26-30] mRNA has an estimated serum half-life of 8 to 10 hours and is not detected in milk beyond 48 hours.[26,27,29,31] Moreover, the mRNA in milk is inactive in producing an immune response.[31] The new mRNA vaccine from Moderna (mNEXSPIKE) has not been studied in nursing mothers, but it contains less mRNA in each dose than Spikevax. The tiny amount of polyethylene glycol-2000 in Pfizer-BioNTech vaccine is not found in breastmilk or absorbed orally, so breastmilk PEG exposure from maternal immunization is not a concern.[32] An inactivated vaccine (CoronaVac) resulted in subacute thyroiditis in 3 healthcare professionals in Türkiye, two of whom were breastfeeding. The reaction was thought to be caused by the aluminum hydroxide adjuvant.[33] Neither of the mRNA vaccines available in the US contains a preservative or adjuvant.

Mothers who receive an mRNA vaccine have marked increases in milk antibodies that are similar to or higher than after a COVID-19 infection. Mothers who had a COVID-19 infection during pregnancy and received a vaccine had higher milk antibody levels than those who had either only an infection or two doses of vaccine during pregnancy.[34-41] Pregnancy may increase the anti-spike IgA and IgM antibodies in milk in a second pregnancy after prior vaccination of COVID-19 infection.[42] Milk IgA antibodies develop within 1 to 2 weeks after the first dose, with a loss in activity of 25 to 30% against the Alpha, Beta and Delta variants relative to the original strain. Milk IgG antibody levels are slower to develop after the first dose of an mRNA vaccine in lactating women, but increase after the second dose and persist in milk longer than IgA. In one study, mothers who had lactated for 24 months or longer had more than double the concentration of anti-viral IgG in their milk than mothers who had breastfed for less than 24 months.[43] Milk antibody levels persist for at least 6 to 8 months after vaccination.[44] There appear to be no major differences in antibody response from the Pfizer-BioNTech and Moderna vaccines, although some studies found a better IgA response to the Moderna vaccine than the Pfizer-BioNTech vaccine.[45-48] Vaccine-induced clones are unique to individuals.[49] Milk antibody response against SARS CoV-2 following the adenovirus vector and inactivated vaccines appear to be considerably weaker and delayed compared to the mRNA vaccines, but are higher after the second dose than after one dose.[45,48,50-56] One study found the weakest breastmilk antibody response to the CanSino vaccine, compared to the Janssen and Pfizer-BioNTech vaccine.[53] Vaccination with an mRNA or adenovirus vaccine increases some proteins in milk, but far fewer and less inflammatory proteins and lipids than SARS-CoV-2 infection.[57] In addition to specific antibodies, several anti-inflammatory and antimicrobial proteins are found in higher concentrations in the milk of vaccinated or previously infected mothers.[58]

A booster of the Pfizer-BioNTech or Moderna vaccine markedly increases IgG milk titers, including following an initial vector vaccine, but IgA titers are affected variably.[37,59-65] A vaccination interval of 3 to 6 weeks appears to generate a better milk antibody response than at 6 to 16 week intervals between vaccinations.[47] Women who had both a SARS-CoV-2 infection and vaccination with an adenovirus vector vaccine (Sputnik V [Gamaleya Institute] or ChAdOx1-S [Astra-Zeneca]) had higher IgA and IgG levels than women who received only a vector vaccine. Women vaccinated with BIBP-CorV (Sinopharm) had similar IgA levels in milk as with the vector vaccine, but lower milk IgG levels.[66]

Some infants have anti-SARS-CoV-2 IgG in their saliva and stool samples after breastfeeding, and although some gastric and intestinal digestion occurs, titers appear sufficient to neutralize SARS-CoV-2.[67,68] Saliva antibodies potentially protect breastfed infants from infection by coating respiratory surfaces. No increase in serum anti-SARS-CoV-2 antibodies are found in infant serum after maternal vaccination unless mothers were vaccinated during pregnancy. The IgG in milk may offer protection to infants against coronaviruses that cause the common cold.[69]

### Drug Levels

Several vaccines for COVID-19, have been developed. Vaccines available in the US (by Pfizer-BioNTech [Comirnaty] and Moderna [Spikevax]) are messenger RNA (mRNA) vaccines. Another mRNA vaccine is available in Europe (CureVac). Other vaccines (by Janssen-Johnson & Johnson [now off the market], Astra-Zeneca [Covishield, Vaxzevria], Sputnik-V in Russia, and CanSino in China) are made using human and primate adenovirus vectors. A third type of vaccine available outside of the US is an inactivated whole-virus SARS-CoV-2 vaccine (by Bharat Biotech [Covaxin] in India, and Sinopharm and Sinovac in China). A fourth type, by Novavax (Nuvaxovid), contains a synthetic version of the S protein plus an adjuvant and a fifth synthetic protein subunit vaccine (Abdala) is produced in Cuba. In general, the Pfizer and Moderna vaccines have been studied the most extensively and have the most information on safety in nursing mothers.[70]

mRNA vaccines are genetically engineered messenger RNA strands that encode for a portion of the SARS-CoV-2 S spike or “S” protein and are encapsulated within lipid nanoparticles. These nanoparticles are microscopic spherical-shaped mixtures of specialized fats, cholesterol, and polyethylene glycol that protect and deliver the mRNA strands to the recipient’s cells after injection. Once inside the vaccine recipient’s cells, mRNA is released, and its genetic code translated into viral S proteins. mRNA does not enter the cell nucleus or alter the cell’s DNA. Those proteins are processed into peptides that are displayed on the cell surface, which then stimulates the antiviral immune response.[71] There is no plausible mechanism for intact, complete, functional viral S proteins to be distributed into the milk from the maternal circulation after immunization. Testing of the milk of mothers who received either the Pfizer-BioNTech or Moderna vaccine found little to no mRNA in their milk.

Adenovirus vaccines. These vaccines are made from adenoviruses vectors that have been genetically engineered so they cannot reproduce in the human body. They are also engineered to contain DNA sequences for the S protein. Once inside the vaccine recipient’s cells, the DNA is transcribed to mRNA, which is then translated into viral S protein the same as with the mRNA vaccines. The adenovirus vaccines do not require a lipid nanoparticle carrier, and thus contain fewer unique ingredients for the breastfed infant to be potentially exposed to compared to the mRNA vaccines. The Janssen-Johnson & Johnson vaccine contains the solubilizer polysorbate 80, a common food additive, in small amounts that are not expected to be harmful to a breastfed infant.

Whole-virus inactivated vaccines. These vaccines are conventional, killed whole-virus particles prepared in a manner that has been used for decades for various vaccines that are safe for breastfeeding.[72,73] The SARS-CoV-2 virus is grown in a cellular medium and then completely denatured so it is not infectious. When injected, the body creates an immune response against the S protein that is capable of neutralizing the virus if infection occurs.

Maternal Levels. Review articles have compiled data that reported SARS-CoV2-binding antibody levels in milk following a maternal mRNA vaccination against SARS-CoV-2 , mostly with Pfizer-BioNTech and the remainder with Moderna. Studies fairly consistently reported an increase in milk IgA levels within 1 to 2 weeks after the first dose, which remained elevated for several weeks after the second dose. Milk IgG levels usually did not rise appreciably after the first dose, but after the second dose, they increased over baseline and persisted longer in milk than IgA. Milk levels of the antibodies paralleled increases in maternal serum at a lower level. Increases in IgA and IgG in milk were generally greater after the vaccination than after natural infection. IgM levels in milk usually did not increase significantly. It is currently unclear for how long the antibodies persist in milk, but they persist for at least 6 months.[50,69,74-80]

One hundred eighty nursing mothers in the US who received two doses of an mRNA vaccine completed a questionnaire for 7 days after each dose of vaccine. More subjects reported adverse effects after the Moderna vaccine than the Pfizer-BioNTech, especially after the second dose. Milk supply decreased in a small number of women, but it was most prevalent after the second dose of the Moderna vaccine. Between 4% and 8% of mothers noted a change in milk color after a dose of vaccine, usually to a blue-green color.[10] Similar adverse reactions were seen in 213 women at a hospital in Hanoi, Vietnam who received the Pfizer-BioNTech vaccine.[81]

A prospective cohort study followed 10 lactating healthcare providers who received their first dose of the Pfizer-BioNTech vaccine approximately 5 months postpartum (mean 154 days, range 68 to 382 days) and the second dose 21 days later. Maternal serum and milk samples taken 7 and 14 days after the first and second doses found that spike- and RBD-specific IgA and IgG responses in milk closely followed the maternal serum responses, with a peak at 7 days after a dose. IgA was predominant at all time points, but the proportion of IgG increased after the second dose. Neutralization capacity for milk against the spike and RBD proteins was observed in all samples.[2]

In a study of milk antibodies following vaccination with an mRNA vaccine (18 Moderna, 12 Pfizer-BioNTech), IgA antibodies increased after the first injection, but not after the second, whereas IgG increased steadily thought the 90-day observation time. Microneutralization activity increased throughout time and both IgA and non-IgA (IgG-containing) fractions of human milk exhibited microneutralization activity against SARS-CoV-2 at 90 days post-vaccination.[3]

Mothers who donated to a milk bank in Nevada, USA and who had either a previous positive COVID-19 PCR test (n = 10), a COVID-19 vaccine (12 Moderna, 7 Pfizer-BioNTech) or were unvaccinated with a negative PCR (n = 13) had their milk studied. The milk titers of IgG against the N501Y mutation were higher in the COVID-19 vaccine group than in the no-vaccine group, but comparable with the COVID-19 PCR-positive group. Other antibody titers did not differ between the three groups. The titers of IgA were higher than those of IgM and IgG in all three groups. The titers of IgM and the inhibition by neutralizing antibodies were higher against the E484K mutation than N501Y. Milk neutralizing antibodies did not differ between the three groups, but the neutralizing antibody-binding inhibition of the two mutant receptor-binding proteins to their receptor was higher in the COVID-19 vaccine and PCR groups than in milk from unvaccinated, PCR-negative women.[82]

Twenty-three women who received an mRNA vaccine (2 Moderna, 21 Pfizer-BioNTech) had antibodies and immune cells measured in their breastmilk before receiving a vaccination and after the first and second doses of the vaccine. Both spike-reactive sIgA and spike-reactive T cells were found in the milk after the second dose of vaccine.[4]

A 70-day study of nursing mothers who had either been infected with SARS-CoV-2 (n = 18) or received the Pfizer-BioNTech vaccine (n = 28) found that the average milk IgA levels were similar between the two groups, although the variability in antibody levels was less in those who received the vaccine. Two women who had milk IgA levels before vaccination developed the highest antibody levels in milk.[83]

Twenty-six women who received a Pfizer-BioNTech vaccine and 3 who received a Moderna vaccine were studied. Milk samples were obtained prevaccination and at 1, 3, and 6 months after the first COVID-19 vaccine dose. Twelve of 24 mothers (50%) at 1 month were positive for SARS-CoV-2-specific IgA, 7 of 27 (26%) were positive for IgA at 3 months and 5 of 12 (42%) were positive at 6 months postvaccination. IgG levels were positive for SARS-CoV-2 antibodies at 1 month in 24 of 24 women, 25 of 27 at 3 months and 9 of 12 women at 6 months postvaccination. IgM levels were present in 29% of 24 women at 1 month, 22% of 27 women at 3 months and 8.3% of 12 women at 6 months postvaccination.[76]

Forty-two serum and milk samples were analyzed for the presence of antibodies after receiving two doses of a vaccine against SARS-Co-V-2 (35 Pfizer-BioNTech, 4 Astra-Zeneca, 1 Moderna, and 1 Astra-Zeneca for the first dose and Pfizer-BioNTech for the second dose). Twenty-four milk samples were collected between 20 days and 1 month after the second dose, 10 between 1 and 2 months and 8 between 3 and 4 months after the second dose. Similar to serum, all milk samples had detectable anti-SARS-CoV-2 IgG, and none had detectable IgA.[84] A subset of these women (17 Pfizer-BioNTech, 4 Astra-Zeneca, 1 both) were randomly selected for further study. In these, the level of IgG antibodies in serum was higher than that in breast milk but the complement-system activation potential was retained by milk antibodies, potentially providing additional protection against COVID-19.[85]

Breastmilk samples were obtained from 35 lactating healthcare workers in Singapore who received the Pfizer-BioNTech vaccine, 31 before their first dose and 4 were just before their second dose. All participants completed the 2-dose course within 21 days. Samples were collected on days 1, 3, 7, 14, and 21 after both doses. There were minimal SARS-CoV-2 neutralizing antibodies present in the breastmilk from day 0 to day 3 after the first dose. The neutralizing antibody levels increased markedly at 28 days (day 7 after dose 2). Only samples from 3 mothers did not have detectable neutralizing antibodies at any of the sampling timepoints up to 42 days. Up to day 21 of the first vaccine dose, SARS-CoV-2 spike RBD-specific IgG1 antibody was detected in the breastmilk of 74%, IgA in 100% and IgM in 84% of mothers. After the second vaccine dose, all mothers had detectable SARS-CoV-2 spike RBD-specific IgG1 and IgA antibody and 89% of mothers had detectable IgM. IgG levels increased markedly 7 days after the second dose and persisted until 21 days after the dose. Five breastmilk samples from 4 mothers had detectable vaccine mRNA, out of 309 samples from 31 mothers tested, with a median concentration of 70 ng/L.[28]

Thirty women who received an mRNA vaccine (20 Pfizer-BioNTech and 10 Moderna). RBD-specific IgA, IgG, and IgM were measured in serial milk samples. Milk samples provided more than 2 weeks after the second dose by 26 of the 30 women were positive for RBD-reactive IgG. Milk samples from only 14 of 30 women were positive for RBD-reactive IgA, and IgM levels were consistently negligible. The levels of Gamma-interferon were higher in milk provided after the first dose and second dose compared with milk provided before receiving the vaccine.[86]

A study of 46 nursing women in Singapore who averaged 13.5 months postpartum and had received the Pfizer-BioNTech vaccine measured the neutralizing IgA antibodies in milk against the original WH-1 strain of SARS-CoV-2 and 4 variants of concern. At 3 to 7 days after the second dose, activity against the Alpha strain was not significantly different from the original WH-1, but activity was reduced by 28 to 33% against the Beta, Gamma and Delta variants. At 4 to 6 weeks after the second dose, activity against all strains was reduced and activity against the Beta, Gamma and Delta variants was reduced by 25 to 30% relative to the original strain.[87]

Twenty-six mother who received an mRNA vaccine against SARS-CoV-2 (Pfizer-BioNTech n = 23, Moderna n = 3) had their milk IgA and IgG levels measured at 30 and 60 days after the second dose. Anti-RBD IgA and IgG antibodies were present in all participants at both time points, although the titers varied considerably among individuals. Fifteen mothers had a higher IgA titer in the first specimen than the second, two had about the same results in both samples, and nine of them had a higher IgA titer in the second sample. All mothers had anti-RBD IgG in breast milk. All mothers excreted anti-RBD IgG in breast milk. For 14 of the first samples, the measured concentrations were higher than the second sample, in 4 the IgG titers were approximately equal in the first and second samples, and for 8 samples the values were higher in the second specimen.[88]

One hundred twenty-four nursing mothers collected 1650 milk samples over 100 days after their first dose of a COVID-19 vaccine. Mothers who received the Pfizer-BioNTech, Moderna, Janssen and AstraZeneca vaccines were included. Milk was positive for IgA in 96 to 97% of mothers who received an mRNA vaccine (Pfizer-BioNTech and Moderna), but only 39 to 48% of mothers who receive a viral vector vaccine (AstraZeneca and Janssen). Milk was positive for IgG in 96 to all mothers who received an mRNA vaccine at 20 to 30 days after the first dose, but only about 30% of mothers who receive a viral vector vaccine had milk positive for IgG until 90 days after the second dose with the AstraZeneca vaccine. The women who received the Janssen vaccine were not followed beyond about 70 days.[45]

Milk samples (n = 30) were collected daily for one week from 5 mothers who received the Pfizer-BioNTech vaccine. None of the milk samples contained measurable amounts of vaccine mRNA.[89]

Ninety-one women received 2 doses of the Pfizer-BioNTech Covid-19 vaccine during pregnancy at an average of 15.2 weeks prior to delivery. All had their milk analyzed on the third postpartum day and all of them had SARS-CoV-2 RBD spike protein antibodies in breastmilk. The amount of antibody in milk was correlated with maternal serum levels and the trimester of immunization. Antibodies in milk were highest with third trimester vaccination and lowest with first trimester vaccination.[90]

A prospective cohort study of 62 postpartum women who were administered the Pfizer-BioNTech COVID-19 mRNA vaccine during the second or third trimester of pregnancy was performed to measure milk antibody titers. Colostrum had higher levels of IgG, IgA, and IgM than mature milk. The level of IgA in mature milk was higher when immunization occurred in the second than in the third trimester but, IgG levels in mature milk were higher when immunization was given during the third trimester.[91]

Twenty-three nursing mothers had breastmilk, saliva and serum collected at 30, 60 and 90 days after their first dose of the Pfizer-BioNTech vaccine. The amounts of IgG and IgA in breastmilk were between 10- and 150-fold lower than in serum. IgA was exclusively of the IgA1 isotype, with no production of the mucosal-specific and protease-resistant IgA2.[92]

A 6-month follow-up of nursing mothers who received the Pfizer-BioNTech vaccine found In the 3- and 6-month follow-up, a progressive decrease in milk antibody levels was seen.[93]

Ten women had breastmilk antibody levels measured from the first dose of the Pfizer-BioNTech vaccine to 1, 3, 6, and 9 months after the first dose and 1 month after a third booster dose of the vaccine.

After the primary vaccine series, SARS CoV-2 specific antibodies increased, peaked at 1 month, and then decreased over time. After the booster, human milk SARS CoV-2 specific IgG levels increased from pre-booster levels and were higher than the initial post primary vaccine series peak. SARS-CoV-2 specific IgA levels showed non-significant increases post-booster compared to pre-booster and post-primary vaccine series. IgM levels changed little over the study period.[60]

Women had milk antibody titers after a late third-trimester infection with SARS CoV-2 (n = 28), or two doses of the Pfizer-BioNTech vaccine during pregnancy (n = 11) or lactation (n = 12). Mothers who were vaccinated had higher IgG milk levels than the mothers who had an infection. Mothers infected late in pregnancy had higher SIgA levels in milk than vaccinated mothers.[94]

Thirty-seven women who received either the Pfizer/BioNTech, Moderna, or Johnson & Johnson vaccine were followed for up to 6 months. Milk SARS CoV-2 IgA and IgG levels were higher at 6 months post-vaccination than prevaccination, but both were lower than after 7 to 30 days post-vaccination. Neutralization capacity was higher 6 months after COVID-19 vaccination than pre-vaccination milk. Milk neutralizing capability to SARS-CoV-2 increased over the 6-month time span, even as SARS-CoV-2 specific antibody concentrations decreased.[7]

Serial milk samples were collected by mothers in Hong Kong who either had a SARS-CoV-2 infection (n = 18; 75 samples) or had a vaccination (n = 8; 93 samples) with an unspecified vaccine. Milk IgA antibody levels and neutralizing capacity peaked rapidly after infection or vaccination, with vaccination levels higher. Neutralizing activity was undetectable by about 150 days after the first dose of the vaccine, but a vaccine booster dose restored secretion of neutralizing IgA. Response to the booster varied among vaccinees.[78]

Sixteen women who had a COVID-19 infection and 5 who had received two doses of the Pfizer-BioNTech vaccine during pregnancy had their milk studied. Seven of the previously infected women received a single dose of the Pfizer-BioNTech vaccine postpartum. Mothers who had a COVID-19 infection during pregnancy and received a single dose of the Pfizer-BioNTech vaccine postpartum had higher milk antibody levels than those who had only an infection or two doses of vaccine during pregnancy.[34]

Out of 11 women who were less than 6 months postpartum and received an mRNA vaccine (6 Pfizer-BioNTech, 5 Moderna), mRNA was detected in 7 milk samples from 5 women. The presence of mRNA did not persist beyond 48 hours after the dose.[29]

One hundred-ten breastfeeding mothers who were vaccinated with either two doses of the Pfizer-BioNTech (n = 70) or Moderna (n = 20) vaccine or one dose of the Astra-Zeneca vaccine (n = 20) provide milk samples at 30 days and 6 months after their last dose. Only 62 mothers were still nursing at 6 months postpartum. Anti-SARS-CoV-2 IgA and IgG antibodies were detected in breastmilk 6 months after receiving the second dose, although their concentrations were lower than concentrations at 30 days after vaccination.[79]

A study of nursing mothers who received three doses of an mRNA vaccine while breastfeeding found that milk anti-spike IgG levels increased and were higher than their levels following the second dose. Milk anti-spike IgA levels also trended higher after receipt of the 3rd dose but was not statistically significantly increased over pre-boost levels and their levels were similar to the post-second dose timepoint.[95]

Twenty women who had received two doses of an mRNA vaccine (17 Pfizer-BioNTech, 3 Moderna) against SARS-CoV-2 had milk samples collected before and about 1 week after the third vaccine dose. Breastmilk cells were collected. Breastmilk contained higher frequencies of T effector and central memory populations that expressed mucosal-homing markers than maternal blood. T cell receptor sequence overlap was limited between blood and breastmilk. Overabundant breastmilk clones were observed in all individuals, including to SARS-CoV-2 spike. SARS-CoV-2 spike-specific T cell receptors were more frequent in breastmilk compared to blood and expanded in breastmilk following a third mRNA vaccine dose.[5]

Twenty-six lactating women received a booster dose of an mRNA vaccine (all but one Pfizer-BioNTech). Thirteen had received an mRNA-based vaccine, namely BNT162b2 (n = 4) or mRNA-1273 (n = 9) initially and the other 13 participants previously completed a vaccination regimen with a vector-based vaccine,(8 AstraZeneca, 5 Janssen). Homologous and heterologous booster vaccination induced a similar change in IgA and IgG antibodies in human milk during the follow-up period. Participants who received homologous booster vaccination had overall higher levels of SARS-CoV-2-specific IgA and IgG in their human milk than those who received heterologous booster vaccination, due to overall higher pre-booster levels.[62]

Sixty-one volunteers (45 SARS-CoV-2 naïve, 16 SARS-CoV-2 recovered) received two doses of the Pfizer-BioNTech vaccine 3 weeks apart. Four women were breastfeeding and provided milk and blood samples. Anti-RBD IgG antibodies were detected in the milk of the breastfeeding women in a pattern similar to their serum levels.[96]

Women who received a primary COVID-19 vaccine during pregnancy (n = 24) or lactation (n = 21) and received a booster vaccine had milk samples taken to measure SARS-CoV-2 anti-nucleoprotein (NP) and anti-receptor binding domain (RBD) IgG and IgA in their milk. The mothers almost exclusively received mRNA vaccines for both their primary and booster doses. Anti-RBD IgG and IgA in milk remained increased through 120 to 170 days after the booster vaccine and did not differ by maternal NP status.[63]

Sixty-three lactating mothers received a COVID-19 mRNA vaccine (57% Moderna and 43% Pfizer-BioNTech). Vaccination led to breast milk secretory IgA (sIgA) and IgG antibodies with consistent viral neutralizing activity. Milk sIgA titers increased further after second vaccination. Twenty-two received a third booster dose and sIgA titers were increased in all who received it and were detectable even 6 months after the third vaccine dose, including women with extended breastfeeding beyond 12 months. Milk IgG antibody titers were higher and more sustained than sIgA. Antibody titers were not associated with individual dyad characteristics or vaccine manufacturer.[97]

Forty-nine lactating mothers in Hong Kong provided milk samples one week after their first and second doses and 1 month after their second dose of the Pfizer-BioNTech vaccine. Peak milk antibody levels occurred 1 week after the second dose. The composition of the human breast milk microbiota changed dynamically throughout the vaccination regimen, but the abundances of beneficial microbes such as Bifidobacterium species did not significantly change after vaccination.[98]

A single-center prospective cohort followed 11 nursing mothers who received a primary series of mRNA SARS-Co-V2 vaccine. IgG and IgA titers increased in breastmilk following each dose, peaking 1 to 4 weeks after series completion. But it did not induce neutralizing antibodies against Omicron BA.4/5. Titers remained elevated for 7 to 9 months, except for in breast milk IgA which returned to baseline within 1 month.[99]

Cuban women vaccinated with 3 doses of a synthetic protein subunit vaccine (Abdala) during pregnancy had milk antibody titers measured. Fifty milk samples were collected 5 weeks after the third dose of the vaccine and 53 were obtained 9 weeks from the 103 women. Antibody levels were compared to those in the milk of 52 nonvaccinated women at least 40 days after the positive RT-PCR- test in women who had contracted COVID-19. High levels of anti-RBD IgA antibodies were detected in breastmilk samples 9 weeks after vaccination and anti-RBD IgG antibodies rose from the fifth to the ninth week. In the post-COVID-19 mothers, the IgG-type response was higher than in both post-vaccination periods. Neutralizing antibody titers were similar in breastmilk from vaccinated and women who had recovered from COVID-19 infection.[100] An extension of this study found that in these same women, their breastmilk antibodies neutralized OmicronBA.5 RBD, although not to as great an extent as the original Wuhan strain.[101] Another study in Cuba compared 2 groups of women either 5 or 9 weeks after the primary series of 3 doses of the Abdala vaccine. Milk IgA antibody titers were greater than IgG titers at 5 weeks postpartum, while IgG titers were greater than IgA titers at 9 weeks post-vaccination. There was no difference in mean neutralizing antibody titers at the two time periods. The neutralizing antibody titers did not correlate with the age of participants, but was diminished in multiparous women and in those with at least one noncommunicable chronic disease.[102]

A study in Thailand compared antibody responses between women who had previously had a COVID-19 infection, a COVID-19 infection plus vaccination or only vaccinated. Vaccinated patients had received a variety of vaccine types. sIgA, sIgG and neutralizing antibodies in milk persisted in for 6 months, no differences in sIgA, sIgG, and neutralizing antibodies observed between lactating mothers receiving two, three, or more than three doses, although mothers who had the infection and vaccine(s) had higher in vitro sIgA and neutralizing antibody titers at 3 months than those who had vaccination alone.[80]

Thirteen postpartum women received a COVID-19 mRNA vaccine (31% Moderna and 69% Pfizer-BioNTech) had milk antibodies measured after each of 3 doses of the vaccine. Subjects who had a documented SARS-CoV-2 infection had more robust IgG1 responses than those who did not after the first 2 doses, but not after the third dose. Spike-specific breastmilk IgA responses were consistently 2-fold lower than spike-specific IgG regardless of history of infection. The highest serum neutralizing activity occurred at 2 weeks after dose 2 and was higher in participants who previously had an infection, but began to wane by 6 months after the first dose in all subjects. Immunization did not elicit detectable breastmilk neutralization, which is inconsistent with other reports.[37]

A study in Brazil followed women vaccinated with various types of vaccines and found that two or three doses provided equivalent neutralizing antibody levels in milk. It also found that mother who were exclusively breastfeeding had higher antibody titers in milk than mothers who were not.[103]

Infant Levels. Sixty-one women vaccinated postpartum with the Pfizer-BioNTech vaccine. SARS-CoV-2 IgG was detected in the oral mucosa of 3 of 5 breastfed infants. None of 21 infants who had serum samples taken had anti-SARS-CoV-2 IgG detected.[104]

A study reported 8 breastfed infants of mothers who received an mRNA vaccine against SARS-CoV-2 at ages between 68 days and 1 year of age. No anti-SARS-CoV-2 IgG, IgM or anti-RBD IgA antibodies were detected in the serum of any of the infants 4 to 10 weeks after the second maternal vaccination.[32]

A study of 31 mother-baby pairs examined the levels of SARS-CoV-2-specific IgA in the blood, and noses of infants whose mothers had received a COVID-19 vaccination either antepartum (Pfizer n = 9, Moderna n = 9) or postpartum (Pfizer n = 6, Moderna n = 7). All infants had detectable total (non-antigen specific) IgA and IgG in the nasal samples, and no significant differences in total IgG, IgA, or IgA/IgG ratio were noted between the two groups, though total IgA was higher than total IgG in both groups. Anti-spike IgG was more frequently detected from the nares of breast milk fed infants in the antepartum group than postpartum group (89% vs. 0%). In the antepartum group, 33% of infants had high anti-spike IgA titers in the nares, whereas none of the infants in the postpartum group had detectable anti-spike IgA in the nares.[105]

Five infants of nursing mothers who received the Pfizer-BioNTech vaccine had a single serum sample collected at a median of 48 days (IQR 44-57) after the second maternal vaccine dose. The age of these infants at the point of maternal vaccination ranged from 3 to 20 months. Of the 5 infants, one was from a mother with detectable vaccine mRNA in both breastmilk and serum and another three were from mothers with vaccine mRNA in the serum. None of the infants had detectable neutralizing antibodies or vaccine mRNA in their serum.[28]

Breastfed infants of 30 women who received an mRNA vaccine (20 Pfizer-BioNTech and 10 Moderna) had stool samples collected 21 days after the second maternal dose. Anti-RBD IgG and anti-RBD IgA were detected in 33% and 30% of infant stool samples, respectively.[86]

Thirteen breastfed infants of Covid-19 naïve mothers who received the Pfizer-BioNTech vaccine had blood samples obtained at 8 weeks after the first maternal dose of the vaccine. Anti-S SARS CoV-2 IgM and IgA antibodies were detected in only 1 of the 13 infantile serum samples. None contained anti-S SARS CoV-2 IgG above the cut-off specified by the manufacturer.[106]

Twenty-three breastfed infants had feces and pharyngeal swabs collected at 30, 60 and 90 days after their mother’s first dose of the Pfizer-BioNTech vaccine. Only traces of antibodies were retrieved from the feces of breastfed infants, and no IgG nor IgA were retrieved from infants’ buccal swabs.[92]

A study of 13 mother-infant pairs found that 6 to 12 months after two doses of the Pfizer-BioNTech vaccine postpartum, SARS-CoV-2 S IgG antibodies in serum was positive in only two of the infants.[107]

Twenty-five breastfed infants whose mothers received either the Pfizer/BioNTech, Moderna, or Johnson & Johnson vaccine were followed up to 6 months. The infants’ stool levels of SARS-CoV-2 IgA and IgG were higher than pre-COVID negative controls.[7]

Eleven infants of mothers who had received two doses of an mRNA vaccine had saliva samples taken between 0 and 3 hours after nursing. Anti-spike IgA levels were higher in infant saliva over time after feeding compared to IgG antibodies, with 6/11 (55%) infants having detectable antibodies immediately after breastfeeding and 3/11 (27%) infants remaining positive at all time points until the next feeding. IgG antibodies were less abundant in the infant’s saliva after feeding.[95]

Infants of women who received a primary COVID-19 vaccine during pregnancy (n = 24) or lactation (n = 21) and received a booster vaccine had blood samples taken to measure SARS-CoV-2 anti-receptor binding domain IgG and IgA in their blood. The mothers almost exclusively received mRNA vaccines for both their primary and booster doses. Anti-RBD IgG and IgA did not increase in infant blood after maternal booster.[63]

Sixty-three nursing mothers received a COVID-19 mRNA vaccine (57% Moderna and 43% Pfizer-BioNTech). Fifty-two of their infants had serum collected for SARS-CoV-2 antibodies. The antibodies were detected only if their mothers had a COVID-19 infection or vaccination during pregnancy.[97]

### Effects in Breastfed Infants

In a cohort study of 180 women who received an mRNA vaccination (71% Pfizer, 29% Moderna) against SARS-CoV-2, some mothers reported side effects in their infants following vaccination. The most common events following the second dose were irritability (10.3% and 10.4% for Pfizer and Moderna, respectively), poor sleep (7.8% and 8.3% for Pfizer and Moderna, respectively), and significantly more drowsiness in children whose mothers received Moderna than Pfizer (6.4% and 0%, respectively).[10] It is not known if these side effects were caused by the vaccine.

Twenty nursing mothers received 2 doses of an inactivated virus vaccine (CoronaVac, Sinovac). None of their breastfed infants had any adverse effects reported.[108]

An on-line survey of 4455 nursing mothers who received either the Pfizer-BioNTech or Moderna vaccine found that 7.1% of mothers reported an adverse effect in their breastfed infant. The most frequent symptoms were increased sleepiness and increased fussiness, both at about 3% of infants, with the frequency greater after the second dose. Less frequently reported side effects included fever, rash, diarrhea, vomiting, changes in feeding frequency, and other miscellaneous symptoms. All were numerically, but not statistically more frequent after the second dose.[9]

A study found that among the breastfed infants of 50 women who receive an mRNA vaccine against COVID-19 during pregnancy or lactation, none had any serious adverse effects. A few reports of minor sleep changes and gastrointestinal symptoms were reported after the first dose of vaccine, but 88% of women reported no infant side effects. None of the infants had any reported symptoms after the second dose.[32]

A prospective study was performed in 88 lactating healthcare workers in Singapore given the Pfizer-BioNTech vaccine for COVID-19. No adverse events (fever, rash, cough, behavioral change, vomiting, or diarrhea) were reported by mothers among infants who were breastfed after maternal vaccination.[11]

Ninety-four mothers who received either the Pfizer-BioNTech or Moderna vaccine completed a questionnaire daily for 14 days after the second dose of the vaccine. Thirty-one percent of mothers observed some event in their breastfed children. Most frequently the children were irritable. During the 14 days of follow-up, 36% of the children were diagnosed with respiratory infection, which could have explained their effects. No infants developed serious adverse events nor were they diagnosed with COVID-19 within the study period.[109]

A 16-month-old breastfed infant developed a fever and a rash on her face and extremities 2 days after vaccination of her mother with the first dose of the Astra-Zeneca vaccine. The rashes disappeared by day 7 after the injection. After the second dose of the Astra-Zeneca vaccine, the infant had a brief fever 2 days after her mother’s dose, but no rash . The authors considered the rash to be possibly related to the vaccine, but not conclusively.[110]

In a follow-up of 10,278 lactating individuals who received a booster dose of either the Pfizer-BioNTech or Moderna vaccine, 121 (1.2%) reported any issues with their breastmilk-fed infant after vaccination.[111]

An on-line survey of mothers in Mexico who received a COVID-19 vaccine (Pfizer–BioNTech, AstraZeneca, CanSinoBIO, Sinovac, Sputnik V, Janssen, or Moderna) found that more symptoms were reported in infants aged 4.1 to 6 months and in those who received the Sinovac vaccine. The most commonly reported side effects in breastfed infants were irritability (2.3%), fever and diarrhea (2.5% each).[112]

None of 26 breastfed infants were reported to have had any side effects after their mothers’ third dose of an mRNA vaccine.[95]

A multicenter survey of 750 breastfeeding women in Bangladesh who received two doses of a COVID-10 vaccine (Pfizer-BioNTech, Moderna, Sinovac, Oxford-AstraZeneca, Johnson and Johnson, or Covaxin) found that only 8 women reported that their infant had symptoms such as fever or runny nose after the mothers received the vaccine. No women reported cough, sore throat, rash, vomiting or diarrhea in their infants.[113]

### Effects on Lactation and Breastmilk

In a cohort study of 180 women who received an mRNA vaccination (71% Pfizer, 29% Moderna) against SARS-CoV-2, some women reported a temporary reduction in milk supply. The percentages of women who reported a decrease in milk supply after the Pfizer vaccine was 7.3% and 8% after the first and second doses, respectively. The percentages of women who reported a decrease in milk supply after the Moderna vaccine was 8% and 23.4% after the first and second doses, respectively. The difference between the two vaccines was statistically significant after the second dose. In all cases, the milk supply returned to normal within 3 days. A few women reported an increase in milk supply after each dose. Five women reported a change in milk color to blue-green after a dose of vaccine.[10]

In an on-line survey of 4455 nursing mothers who received either the Pfizer-BioNTech or Moderna vaccine, 3.9% reported an increase in milk production and 6% reported a decrease in milk production. The remainder of mothers reported no change in milk production.[9]

A prospective study was performed in 88 lactating healthcare workers in Singapore given the Pfizer-BioNTech vaccine for COVID-19. No participant reported a change in milk supply. One reported a transient bluish-green tinge to her milk color after her first vaccine dose but not after her second dose.[11]

A teratology information service in the Netherlands received reports of 194 women who experienced a decrease in milk supply after receiving the COVID-19 vaccine (89% Pfizer-BioNTech). The median time to the decrease was one day and the median duration was 4 days. Ten percent of women reported complete cessation of breastfeeding. These mothers had infant who were a median of 5.25 weeks old compared with 8 weeks for the entire cohort.[77]

A survey of 1784 lactating women in Singapore who received either the Pfizer-BioNTech (79% of respondents), Moderna, Sinovac or Astra-Zeneca vaccine found that 5.6 to 14.4% of women reported either an increase or decrease in milk supply. Those who received non-mRNA vaccines were less likely to report any change in milk supply or soreness in the breasts compared to those who received mRNA vaccines. Exclusively breastfeeding women were more likely to report breast engorgement and changes in breast milk supply. Symptoms lasted a median of 3 days. Overall, 2.3% and 2.4% of women reported a change in milk color following one or two doses, respectively.[114]

A prospective study was performed with 382 breastfeeding physicians in Italy who received the Pfizer-BioNTech Covid-19 vaccine. Among infants of breastfeeding mothers, 6 experienced fever, 5 rash and 4 moderate and self-limiting diarrhea.[115]

In a follow-up of 10,279 lactating individuals who received a booster dose of either the Pfizer-BioNTech or Moderna vaccine, 83 (0.8%) reported an increase in milk supply, and 355 (3.5%) reported a decrease in milk supply.[111]

Twenty-six women who had 2 doses of a COVID-19 vaccine (23 Pfizer-BioNTech and 3 Moderna) provided milk samples at 30 and 60 days after their second dose. Ten cytokines were measured in milk and compared to the milk of control mothers and women who had contracted mild COVID-19. The cytokines were TNF-alpha, IFN-beta, IL-1beta, IL-2, IL-5, IL-6, IL-10, IFN-gamma, GM-CSF, and IP-10. There were no differences in the concentrations of any of the cytokines in any of the groups at any time.[116]

An analysis of 6,474 reports in the World Health Organization’s VigiBase associated with COVID-19 vaccine during lactation was performed. Reactions coded as “functional lactation disorders” showed a significant disproportionate reporting for COVID-19 vaccines during lactation. Further analysis indicated that this was associated with a 2.76 fold risk of mastitis.[117]

A multicenter survey of 750 breastfeeding women in Bangladesh who received two doses of a COVID-10 vaccine (Pfizer-BioNTech, Moderna, Sinovac, Oxford-AstraZeneca, Johnson and Johnson, or Covaxin) was performed. One woman reported a reduction in milk supply, two reported breast engorgement and one reported breast soreness following vaccination. None reported a change in milk color. [113]

Milk from nursing mothers who had either had a SARS-CoV-2 infection, an original mRNA vaccine (n = 25 Pfizer, 23 Moderna) or an adenovirus vector vaccine (n = 13, Johnson and Johnson) was studied using a multi-omics approach. SARS-CoV-2 infection was associated with 195 increased and 190 decreased lipid molecular species, in general elevating pro-inflammatory lipids and reducing anti-inflammatory ones. The vaccines did not affect milk lipids. SARS-CoV-2 infection was associated with changes to 67 proteins in milk with 43 proteins exhibiting significant increases and proteins 24 exhibiting significant decreases. These proteins were mainly associated with systemic inflammatory responses to SARS-CoV-2 and other viral infections and inflammatory conditions, such as inflammatory bowel disease. In contrast, milk produced by women receiving an mRNA vaccine exhibited changes to 13 or fewer proteins. Unlike infection, vaccination was not associated with NOD-like receptor signaling, aldosterone synthesis and secretion, and inflammatory bowel disease pathways.[30]

### References

1 Ashique S, Mondal M, Hussain MS, et al. Safety and efficacy of COVID-19 vaccines in pregnant and lactating women: A comprehensive review. Inflammopharmacology 2026;34:2873–88.42009999
2 Rosenberg-Friedman M, Kigel A, Bahar Y, et al. BNT162b2 mRNA vaccine elicited antibody response in blood and milk of breastfeeding women. Nat Commun 2021;12:6222.34711825
3 Young BE, Seppo AE, Diaz N, et al. Association of human milk antibody induction, persistence, and neutralizing capacity with SARS-CoV-2 infection vs mRNA vaccination. JAMA Pediatr 2022;176:159–68.34757387
4 Gonçalves J, Juliano AM, Charepe N, et al. Secretory IgA and T cells targeting SARS-CoV-2 spike protein are transferred to the breastmilk upon mRNA vaccination. Cell Rep Med 2021;2:100468.34873588
5 Armistead B, Jiang Y, Carlson M, et al. Spike-specific T cells are enriched in breastmilk following SARS-CoV-2 mRNA vaccination. Mucosal Immunol 2023;16:39–49.36642379
6 Yin K, Li L, Luo X, et al. Pregnancy and lactation induce distinct immune responses to COVID-19 booster vaccination and SARS-CoV-2 breakthrough infection. JCI Insight 2025;10:e191930.40693463
7 Stafford LS, Valcarce V, Henry M, et al. Detection of SARS-CoV-2 IgA and IgG in human milk and breastfeeding infant stool 6 months after maternal COVID-19 vaccination. J Perinatol 2023;43:775–81.36631564
8 Covelli I, Haghighi C, Frank Y, et al. Short-Term breastfeeding and breastmilk supply changes associated with presence of systemic symptoms following COVID-19 vaccination among lactating individuals. Am J Obstet Gynecol 2023;228:S776–S7. doi:10.1016/j.ajog.2022.11.122
9 McLaurin-Jiang S, Garner CD, Krutsch K, et al. Maternal and child symptoms following COVID-19 vaccination among breastfeeding mothers. Breastfeed Med 2021;16:702–9.34171971
10 Bertrand K, Honerkamp-Smith G, Chambers CD. Maternal and child outcomes reported by breastfeeding women following messenger RNA COVID-19 vaccination. Breastfeed Med 2021;16:697–701.34492204
11 Low JM, Lee LY, Ng YPM, et al. Breastfeeding mother and child clinical outcomes after COVID-19 vaccination. J Hum Lact 2022;38:37–42.34713745
12 Girardi G, Bremer AA. Scientific evidence supporting coronavirus disease 2019 (COVID-19) vaccine efficacy and safety in people planning to conceive or who are pregnant or lactating. Obstet Gynecol 2022;139:3–8.34727554
13 Fu W, Sivajohan B, McClymont E, et al. Systematic review of the safety, immunogenicity, and effectiveness of COVID-19 vaccines in pregnant and lactating individuals and their infants. Int J Gynaecol Obstet 2022;156:406–17.34735722
14 Trehan S, Wszołek K, Rook A, et al. Colorful concerns: Exploring perceived reasons for and maternal-infant reactions to human milk color changes through a cross-sectional study. J Hum Lact 2026:8903344261431671.42080305
15 American College of Obstetricians and Gynecologists. Practice Advisory. Vaccinating pregnant and lactating patients against COVID-19. July 30, 2021 https://www.acog.org/clinical/clinical-guidance/practice-advisory/articles/2020/12/vaccinating-pregnant-and-lactating-patients-against-covid-19
16 Centers for Disease Control and Prevention. COVID-19 vaccines while pregnant or breastfeeding. Dec. 6, 2021 https://www.cdc.gov/coronavirus/2019-ncov/vaccines/recommendations/pregnancy.html?s_cid510484:covid%20vaccine%20for%20pregnant:sem.ga:p:RG:GM:gen:PTN:FY21
17 Davanzo R, Agosti M, Cetin I, et al. Breastfeeding and COVID-19 vaccination: Position statement of the Italian scientific societies. Ital J Pediatr 2021;47:45.33639998
18 Martins I, Louwen F, Ayres-de-Campos D, et al. EBCOG position statement on COVID-19 vaccination for pregnant and breastfeeding women. Eur J Obstet Gynecol Reprod Biol 2021;262:256–8.34020833
19 Kasi SG, Dhir SK, Shivananda S, et al. Breastfeeding and coronavirus disease 2019 (COVID-19) vaccination: Position statement of the Indian Academy of Pediatrics/Advisory Committee on Vaccination and Immunization Practices. Indian Pediatr 2021;58:647–9.34315833
20 Donders GGG, Grinceviciene S, Haldre K, et al. ISIDOG Consensus Guidelines on COVID-19 Vaccination for Women before, during and after Pregnancy. J Clin Med 2021;10:2902.34209801
21 Sculli MA, Formoso G, Sciacca L. COVID-19 vaccination in pregnant and lactating diabetic women. Nutr Metab Cardiovasc Dis 2021;31:2151–5.34039507
22 Society for Maternal Fetal Medicine. SMFM: Provider considerations for engaging in COVID-19 vaccine counseling with pregnant and lactating patients. August 23, 2021https://s3.amazonaws.com/cdn.smfm.org/media/2641/Provider_Considerations_for_Engaging_in_COVID_Vaccination_Considerations_12-15-20_(final).pdf
23 Novillo B, Martínez-Varea A. COVID-19 vaccines during pregnancy and breastfeeding: A systematic review. J Pers Med 2022;13:40.36675701
24 Shook LL, Edlow AG. Safety and efficacy of coronavirus disease 2019 (COVID-19) mRNA vaccines during lactation. Obstet Gynecol 2023;141:483–91.36649326
25 Nicolaidou V, Georgiou R, Christofidou M, et al. Detection of SARS-CoV-2-specific antibodies in human breast milk and their neutralizing capacity after COVID-19 vaccination: A systematic review. Int J Mol Sci 2023;24:2957.36769279
26 Golan Y, Prahl M, Cassidy A, et al. Evaluation of messenger RNA From COVID-19 BTN162b2 and mRNA-1273 vaccines in human milk. JAMA Pediatr 2021;175:1069–71.34228115
27 Low JM, Gu Y, Ng MSF, et al. Codominant IgG and IgA expression with minimal vaccine mRNA in milk of BNT162b2 vaccinees. NPJ Vaccines 2021;6:105.34413319
28 Yeo KT, Chia WN, Tan CW, et al. Neutralizing activity and SARS-CoV-2 vaccine mRNA persistence in serum and breastmilk after BNT162b2 vaccination in lactating women. Front Immunol 2022;12:783975.35087517
29 Hanna N, Heffes-Doon A, Lin X, et al. Detection of messenger RNA COVID-19 vaccines in human breast milk. JAMA Pediatr 2022;176:1268–70.36156636
30 Couvillion SP, Nakayasu ES, Webb-Robertson BM, et al. Associations between SARS-CoV-2 Infection or COVID-19 Vaccination and Human Milk Composition: A Multi-Omics Approach. J Nutr 2024;154:3566–74.39396761
31 Hanna N, De Mejia CM, Heffes-Doon A, et al. Biodistribution of mRNA COVID-19 vaccines in human breast milk. EBioMedicine 2023;96:104800.37734205
32 Golan Y, Prahl M, Cassidy AG, et al. COVID-19 mRNA vaccination in lactation: Assessment of adverse effects and transfer of anti-SARS-CoV2 antibodies from mother to child. Front Immunol 2021;12:777103.34804068
33 İremli BG, Şendur SN, Ünlütürk U. Three cases of subacute thyroiditis following SARS-COV-2 vaccine: Postvaccination ASIA syndrome. J Clin Endocrinol Metab 2021;106:2600–5.34043800
34 Olearo F, Radmanesh LS, Felber N, et al. Anti-SARS-CoV-2 antibodies in breast milk during lactation after infection or vaccination: A cohort study. J Reprod Immunol 2022;153:103685.36029724
35 Khalifeh M, Rubin LG, Dayya D, et al. SARS-CoV-2 neutralizing antibody titers in maternal blood, umbilical cord blood, and breast milk. J Perinatol 2023;44:28–34.38092879
36 Temocin F, Çaycı YT, Seren C, et al. Investigation of anti-SARS-CoV-2-specific IgG levels in breast milk after vaccination or COVID-19 infection. Am J Perinatol 2024;41:e3085–e90.37846474
37 Williams CA, Murphy EA, Gross M, et al. SARS-CoV-2 vaccine elicited antibody responses in human milk. J Pediatric Infect Dis Soc 2024;14:1–3.39238169
38 Korchinski I, Marquez C, McClymont E, et al. Maternal-infant transfer of SARS-CoV-2 antibodies following vaccination in pregnancy: A prospective cohort study. Vaccine 2024;42:126123.38981741
39 Perretta R, Torca JJB, De Luca G, et al. BM study: A monocentric prospective observational cohort study on neonatal humoral immunity against COVID-19 secondary to transplacental antibody transfer and breastfeeding. Ital J Pediatr 2025;51:203.40598392
40 Aguilar G, Tapia-Calle G, Robinson C, et al. Safety, immunogenicity and pregnancy outcomes in mothers and infants after vaccination with an adenovirus-vector COVID-19 vaccine during pregnancy. Hum Vaccin Immunother 2025;21:2538340.40808283
41 Gray KJ, Bordt EA, Atyeo C, et al. COVID-19 vaccine response in pregnant and lactating women: A cohort study. Am J Obstet Gynecol 2021;225:303 e1– e17.
42 Hochmayr C, Toferer M, Hammerl M, et al. Breast milk anti-S1RBD immunoglobulin concentrations throughout lactation: An observational report. Acta Paediatr 2024;113:81–3.37814794
43 Romero Ramírez DS, Lara Pérez MM, Pérez MC, et al. SARS-CoV-2 antibodies in breast milk after vaccination. Pediatrics 2021;148:e2021052286.34408089
44 Mazzoli F, Vieira ISA, Costa Accd, et al. Difference in neutralizing antibodies percentages against SARS-CoV-2 in vaccinated breastfeeding women's milk and blood. Cien Saude Colet 2026;31:e09792024.42018878
45 Juncker HG, Mulleners SJ, Coenen ERM, et al. Comparing human milk antibody response after 4 different vaccines for COVID-19. JAMA Pediatr 2022;176:611–2.35285889
46 Juncker HG, Mulleners SJ, Ruhé EJM, et al. Comparing the human milk antibody response after vaccination with four COVID-19 vaccines: A prospective, longitudinal cohort study in the Netherlands. eClinicalMedicine 2022;47:101393.35465077
47 Ismail S, Unger S, Budylowski P, et al. SARS-CoV-2 antibodies and their neutralizing capacity against live virus in human milk after COVID-19 infection and vaccination: prospective cohort studies. Am J Clin Nutr 2024;119:485–95.38309831
48 Hamouda NI, Amin AM, Hasan MT, et al. Persistence of COVID-19 human milk antibodies after maternal COVID-19 vaccination: systematic review and meta-regression analysis. Cureus 2024;16:e59500.38826925
49 de Graaf SC, Bondt A, van Rijswijck DMH, et al. A case series exploring the human milk polyclonal IgA1 response to repeated SARS-CoV-2 vaccinations by LC-MS based fab profiling. Front Nutr 2023;10:1305086.38288064
50 Whited N, Cervantes J. Antibodies against SARS-CoV-2 in human breast milk after vaccination: A systematic review and meta-analysis. Breastfeed Med 2022;17:475–83.35325550
51 Yang X, Fox A, DeCarlo C, et al. Comparative profiles of SARS-CoV-2 spike-specific human milk antibodies elicited by mRNA- and adenovirus-based COVID-19 vaccines. Breastfeed Med 2022;17:638–46.35675683
52 Selma-Royo M, Bäuerl C, Mena-Tudela D, et al. Anti-SARS-CoV-2 IgA and IgG in human milk after vaccination is dependent on vaccine type and previous SARS-CoV-2 exposure: a longitudinal study. Genome Med 2022;14:42.35449030
53 Cabanillas-Bernal O, Cervantes-Luevano K, Flores-Acosta GI, et al. COVID-19 neutralizing antibodies in breast milk of mothers vaccinated with three different vaccines in Mexico. Vaccines (Basel) 2022;10:629.35455378
54 Li X, Hu Y, Lv Y, et al. SARS-CoV-2 antibodies in human milk after mRNA and adenovector-based vaccination: A systematic review and meta-analysis. J Hum Lact 2024;40:425–33.38798078
55 Verma S, Yadav A, Venkatesh V, et al. SARS-CoV-2 antibodies in breast milk of women given one & two doses of COVID-19 vaccine. Indian J Med Res 2024;160:501–5.39737512
56 Muyldermans J, Embacher S, Maertens K, et al. The COVALAC Study: The impact of COVID-19 vaccination during lactation on SARS-CoV-2-specific antibodies in human milk-a prospective cohort study. J Hum Lact 2026:8903344261428225.41896708
57 Saffari M, Bahri N, Ghorbani M, et al. Effects of herbal medicines on nipple fissures: A systematic review. Jundishapur Journal of Natural Pharmaceutical Products 2022;17:e111321. doi:10.5812/jjnpp.111321
58 Trofin F, Cianga P, Constantinescu D, et al. The legacy of COVID-19 in breast milk: The association of elevated anti-inflammatory and antimicrobial proteins with vaccination or infection. Curr Issues Mol Biol 2025;47:182.40136436
59 Henle AM. Increase in SARS-CoV-2 RBD-specific IgA and IgG antibodies in human milk from lactating women following the COVID-19 booster vaccination. J Hum Lact 2023;39:51–8.36398916
60 Bender JM, Lee Y, Cheng WA, et al. Coronavirus disease 2019 vaccine booster effects are seen in human milk antibody response. Front Nutr 2022;9:898849.35685893
61 Marshall NE, Blanton MB, Doratt BM, et al. SARS-CoV-2 vaccine booster elicits robust prolonged maternal antibody responses and passive transfer via the placenta and breastmilk. Am J Obstet Gynecol MFM 2023;5:100830.36462615
62 Mulleners SJ, Juncker HG, Ruhé EJM, et al. Comparing the SARS-CoV-2-specific antibody response in human milk after homologous and heterologous booster vaccinations. Commun Biol 2023;6:100.36697496
63 Rick AM, Lentscher A, Xu L, et al. Impact of maternal SARS-CoV-2 booster vaccination on blood and breastmilk antibodies. PLoS One 2023;18:e0287103.37310982
64 Valcarce V, Stafford LS, Neu J, et al. COVID-19 booster enhances IgG mediated viral neutralization by human milk in vitro. Front Nutr 2024;11:1289413.38406184
65 Muñoz FM, Beigi R, Posavad CM, et al. Enhanced D614G and Omicron variants antibody persistence in infants at 2 months of age following maternal mRNA booster vaccination during pregnancy or postpartum. Pediatr Infect Dis J 2024;43:1065–73.39774938
66 Longueira Y, Ojeda DS, Battistelli RBA, et al. SARS-CoV-2-Specific IgG and IgA response in maternal blood and breastmilk of vaccinated naïve and convalescent lactating participants. Front Immunol 2022;13:909995.36263055
67 Calvo-Lerma J, Bueno-Llamoga P, Bäuerl C, et al. Persistence of anti SARS-CoV-2 antibodies in breast milk from infected and vaccinated women after in vitro-simulated gastrointestinal digestion. Nutrients 2022;14:2117.35631258
68 Pieri M, Maniori MA, Shahabian L, et al. Survival of vaccine-induced human milk SARS-CoV-2 IgG, IgA and SIgA immunoglobulins across simulated human infant gastrointestinal digestion. Nutrients 2022;14:3368.36014873
69 Wang J, Young BE, Li D, et al. Broad cross-reactive IgA and IgG against human coronaviruses in milk induced by COVID-19 vaccination and infection. Vaccines (Basel) 2022;10:980.35746588
70 Valverde-Merino MI, Gomez-Guzman M, Piquer-Martinez C, et al. The importance of COVID-19 vaccination during lactation. Infect Dis Now 2024;54:104831.37952583
71 Le TK, Paris C, Khan KS, et al. Nucleic acid-based technologies targeting coronaviruses. Trends Biochem Sci 2021;46:351–65.33309323
72 Anderson PO. Maternal vaccination and breastfeeding. Breastfeed Med 2019;14:215–7.30888205
73 Blumberg D, Sridhar A, Lakshminrusimha S, et al. COVID-19 vaccine considerations during pregnancy and lactation. Am J Perinatol 2021;38:523–8.33932943
74 Jorgensen SCJ, Burry L, Tabbara N. Role of maternal COVID-19 vaccination in providing immunological protection to the newborn. Pharmacotherapy 2022;42:58–70.34816467
75 De Rose DU, Salvatori G, Dotta A, et al. SARS-CoV-2 vaccines during pregnancy and breastfeeding: A systematic review of maternal and neonatal outcomes. Viruses 2022;14:539.35336947
76 Perez SE, Luna Centeno LD, Cheng WA, et al. Human milk SARS-CoV-2 antibodies up to 6 months after vaccination. Pediatrics 2022;149:e2021054260.34981122
77 Lamers M, van der Mijle A, van Hunsel F, et al. COVID-19 vaccination during breastfeeding and its possible negative effect on milk production and supply: A preliminary observation. Breastfeed Med 2022;17:627–8.35426744
78 Leung HYH, Leung BW, Gil MM, et al. SARS-CoV-2-specific antibodies and neutralization capacity in breast milk following infection vs vaccination. Ultrasound Obstet Gynecol 2022;60:425–7.35653222
79 Lechosa-Muñiz C, Paz-Zulueta M, Irure-Ventura J, et al. Development of SARS-CoV-2 specific IgG and IgA antibodies in serum and milk with different SARS-COV-2 vaccines in lactating women. Int Breastfeed J 2023;18:3.36627706
80 Suteerojntrakool O, Mekangkul E, Maitreechit D, et al. Preservation of anti-SARS-CoV-2 neutralizing antibodies in breast milk: Impact of maternal COVID-19 vaccination and infection. Breastfeed Med 2024;19:340–8.38506333
81 Thanh NTM, Hang LT, Hung MT, et al. Safety of and adverse reactions to the COVID-19 vaccine among pregnant and breastfeeding women. Med Sci (Basel) 2025;13:38.40265385
82 Demers-Mathieu V, Hakansson AP, Hall S, et al. Functional antibodies against SARS-CoV-2 receptor binding domain variants with mutations N501Y or E484K in human milk from COVID-19-vaccinated, -recovered, and -unvaccinated women. Breastfeed Med 2022;17:163–72.34809492
83 Juncker HG, Mulleners SJ, van Gils MJ, et al. Comparison of SARS-CoV-2-specific antibodies in human milk after mRNA-based COVID-19 vaccination and infection. Vaccines (Basel) 2021;9:1475.34960222
84 Scrimin F, Campisciano G, Comar M, et al. IgG and IgA antibodies post SARS-CoV-2 vaccine in the breast milk and sera of breastfeeding women. Vaccines (Basel) 2022;10:125.35062786
85 Agostinis C, Toffoli M, Balduit A, et al. Anti-spike antibodies present in the milk of SARS-CoV-2 vaccinated mothers are complement-activating. Int J Mol Sci 2023;24:4395.36901824
86 Narayanaswamy V, Pentecost BT, Schoen CN, et al. Neutralizing antibodies and cytokines in breast milk after coronavirus disease 2019 (COVID-19) mRNA vaccination. Obstet Gynecol 2022;139:181–91.35104067
87 Low JM, Gu Y, Ng MSF, et al. Human milk antibodies after BNT162b2 vaccination exhibit reduced binding against SARS-CoV-2 variants of concern. Vaccines 2022;10:225.35214683
88 Trofin F, Nastase EV, Iancu LS, et al. Anti-RBD IgA and IgG response and transmission in breast milk of anti-SARS-CoV-2 vaccinated mothers. Pathogens 2022;11:286.35335610
89 Mattar CNZ, Koh W, Seow Y, et al. BNT162B2 COVID-19 mRNA vaccination did not promote substantial anti-syncytin-1 antibody production nor mRNA transfer to breast milk in an exploratory pilot study. Ann Acad Med Singap 2022;51:309–12.35658155
90 Popescu DE, Cîtu C, Jura AMC, et al. The benefits of vaccination against SARS-CoV-2 during pregnancy in favor of the mother/newborn dyad. Vaccines 2022;10:848.35746456
91 Kigel A, Vanetik S, Mangel L, et al. Maternal immunization during the second trimester with BNT162b2 mRNA vaccine induces a robust IgA response in human milk: A prospective cohort study. Am J Clin Nutr 2023;118:572–8.37479184
92 Pietrasanta C, Darwich A, Ronchi A, et al. Humoral response to anti-SARS-CoV-2 vaccine in breastfeeding mothers and mother-to-infant antibody transfer through breast milk. NPJ Vaccines 2022;7:63.35739127
93 Esteve-Palau E, Gonzalez-Cuevas A, Guerrero ME, et al. Quantification and progress over time of specific antibodies against severe acute respiratory syndrome Coronavirus 2 in breast milk of lactating women vaccinated with BNT162b2 Pfizer-BioNTech Coronavirus disease 2019 vaccine (LacCOVID). Open Forum Infect Dis 2022;9:ofac239.35783685
94 Conti MG, Terreri S, Terrin G, et al. Severe acute respiratory syndrome Coronavirus 2 infection versus vaccination in pregnancy: Implications for maternal and infant immunity. Clin Infect Dis 2022;75 (Suppl 1):S37–S45.35535796
95 Golan Y, Ilala M, Li L, et al. Milk antibody response after 3(rd) COVID-19 vaccine and SARS-CoV-2 infection and implications for infant protection. iScience 2023;26:107767.37731614
96 Cavic M, Nesic A, Mirjacic Martinovic K, et al. Detection of humoral and cellular immune response to anti-SARS-CoV-2 BNT162b2 vaccine in breastfeeding women and naïve and previously infected individuals. Sci Rep 2023;13:6271.37069315
97 Ware J, McElhinney K, Latham T, et al. Sustained and boosted antibody responses in breast milk after maternal SARS-CoV-2 vaccination. Breastfeed Med 2023;18:612–20.37615566
98 Zhao S, Lok KYW, Sin ZY, et al. COVID-19 mRNA vaccine-mediated antibodies in human breast milk and their association with breast milk microbiota composition. NPJ Vaccines 2023;8:151.37798293
99 Hsiao HM, DiMaggio LS, Perez MA, et al. SARS-CoV-2 antibody profiles in maternal serum and breast milk following mRNA COVID-19 vaccination: A longitudinal prospective observational cohort study. Vaccines (Basel) 2023;11:1643.38005975
100 Pérez-Bernal M, Hernández C, Ibargollín R, et al. SARS-CoV-2 spike RBD-specific IgA and IgG antibodies in breast milk after vaccination with the protein subunit vaccine Abdala. Infect Med (Beijing) 2022;1:253–61.38013910
101 Pérez-Bernal M, Hernández C, Ibargollín R, et al. Anti-SARS-CoV-2 Omicron BA.5 RBD antibody titers generated by the protein subunit vaccine Abdala in breast milk. Vacunas 2024;25:331–9. doi:10.1016/j.vacun.2024.05.001
102 Pèrez-Bernal M, Hernández C, Ibargollín R, et al. Chronic diseases and multiparity affect the neutralizing titers anti-SARS-COV-2 generated in breast milk by primovacination with Abdala. Acta Bioclinica 2025;15:267–96. doi:10.53766/AcBio/2025.15.29.12
103 Amaral Y, Nardi AE, Marano D, et al. Infant passive protection against coronavirus through exclusive breastfeeding: A cross-sectional study. Nutrients 2024;17 39796450
104 Schwartz A, Nir O, Toussia-Cohen S, et al. Presence of SARS-CoV-2 antibodies in lactating women and their infants following BNT162b2mRNA vaccine. Am J Obstet Gynecol 2021;225:577–9.34352250
105 Sajadi MM, Shokatpour N, Purcell M, et al. Maternal transfer of IgA and IgG SARS-CoV-2 specific antibodies transplacentally and via breast milk feeding. PLoS One 2023;18:e0284020.37023025
106 Lebbe B, Reynders M, Van Praet JT. The transfer of vaccine-generated SARS-CoV-2 antibodies into infantile circulation via breastmilk. Int J Gynaecol Obstet 2022;158:219–20.35212411
107 Kociszewska-Najman B, Jaskólska M, Taradaj K, et al. Assessment of anti m-RNA SARS-CoV-2 (BNT162b2) antibody titres in mother and child pairs of breastfeeding women vaccinated post-delivery. Vaccines (Basel) 2022;10:1089.35891253
108 Calil VMLT, Palmeira P, Zheng Y, et al. CoronaVac can induce the production of anti-SARS-CoV-2 IgA antibodies in human milk. Clinics (Sao Paulo) 2021;76:e3185.34190859
109 Romero Ramírez DS, Suárez Hernández MI, Fernández Vilar AM, et al. Evaluation of adverse effects in nursing mothers and their infants after COVID-19 mRNA vaccination. Breastfeed Med 2022;17:412–21.35263195
110 Diogo P, Correia G, Martins JB, et al. Delayed cutaneous adverse reaction of the AstraZeneca COVID-19 vaccine in a breastfed female infant: A coincidence or a rare effect? Vaccines (Basel) 2022;10:602.35455352
111 Kachikis A, Englund JA, Covelli I, et al. Analysis of vaccine reactions after COVID-19 vaccine booster doses among pregnant and lactating individuals. JAMA Netw Open 2022;5:e2230495.36074467
112 Camacho Moll ME, Salinas Martínez AM, Tovar Cisneros B, et al. Side effects of COVID-19 vaccines in pregnant and lactating Mexican women and breastfed infants: A survey-based study. Vaccines (Basel) 2023;11:1280.37631848
113 Low JM, Afroze S, Al Mamun MA, et al. Short term outcomes of COVID-19 vaccines among lactating mother and child dyads in Bangladesh: A multi-centre, cross-sectional study. Matern Child Health J 2024;28:1080–85.38252330
114 Jacob-Chow B, Vasundhara KL, Cheang HK, et al. Reactogenicity of mRNA- and non-mRNA-Based COVID-19 vaccines among lactating mother and child dyads. Vaccines (Basel) 2022;10:1094.35891258
115 Montalti M, Guaraldi F, Di Valerio Z, et al. Adherence to and early adverse events of COVID-19 vaccine in a cohort of 600 Italian breastfeeding and pregnant physicians. Hum Vaccin Immunother 2022:2106747.35944074
116 Trofin F, Dorneanu OS, Constantinescu D, et al. Cytokines and chemokines in breastmilk of SARS-CoV-2 infected or COVID-19 vaccinated mothers. Vaccines (Basel) 2022;10:2001.36560410
117 Kang D, Choi A, Park S, et al. Safety of COVID-19 vaccination during pregnancy and lactation: A VigiBase analysis. J Korean Med Sci 2024;39:e3.38193325

## Substance Identification

### Substance Name

COVID-19 Vaccines

### Drug Class

Breast Feeding

Lactation

Milk, Human

Vaccines